# Sulfisoxazole

CASRN: 127-69-5

## Drug Levels and Effects

### Summary of Use during Lactation

With healthy, fullterm infants it appears acceptable to use sulfisoxazole during breastfeeding after the newborn period.[1,2] Until further data are accumulated, alternate agents should probably be used in jaundiced, ill, stressed or premature infants, because of the risk of bilirubin displacement and kernicterus. Sulfisoxazole should be avoided while breastfeeding a glucose-6-phosphate dehydrogenase (G6PD) deficient infant.

### Drug Levels

Maternal Levels. Following oral sulfisoxazole doses of 1 g every 6 hours for 4 doses to 6 women (time postpartum not stated), an average total recovery of sulfisoxazole and N4-acetylsulfisoxazole of 18 mg was obtained during the 48 hours from the time of the first dose. About 77% of the drug in milk was recovered as the metabolite. This averaged 0.45% of the maternal dose (not weight-adjusted).[3] This study may have underestimated the amount excreted by a small fraction, because steady-state metabolite serum levels were not achieved during the study period.[1,4]

Infant Levels. A 9-month-old infant was breastfed twice daily during maternal treatment for a urinary tract infection (dosage not stated). Urine was collected during a 24-hour time period from the infant. The infant excreted 1.1 mg of sulfisoxazole plus N4-acetylsulfisoxazole over the time period.[3]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Sulfamethoxazole, Trimethoprim-Sulfamethoxazole

### References

1 Kauffman RE. Sulfisoxazole in human milk. Reply. J Pediatr 1981;99:172-3.7431180
2 Chung AM, Reed MD, Blumer JL. Antibiotics and breast-feeding: A critical review of the literature. Paediatr Drugs 2002;4:817-37.12431134
3 Kauffman RE, O'Brien C, Gilford P. Sulfisoxazole secretion into human milk. J Pediatr 1980;97:839-41.7431180
4 Elliott GT, Quinn SL. Sulfisoxazole in human milk. J Pediatr 1981;99:171-3.7252664

## Substance Identification

### Substance Name

Sulfisoxazole

### CAS Registry Number

127-69-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Sulfonamides